# Cefazolin

CASRN: 25953-19-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates cefazolin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefazolin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single 500 mg dose of cefazolin intramuscularly to 4 women, cefazolin was barely detectable in the mother's milk and not detected in their breastfed infants' serum.[1]

After intramuscular doses of cefazolin 500 mg three times daily in 10 women, the peak concentration of cefazolin in milk was 0.9 mg/L.[2]

Twenty women were given 2 grams of cefazolin intravenously over 10 minutes. Average milk levels were 1.25 mg/L at 2 hours, 1.51 mg/L at 3 hours and 1.16 mg/L at 4 hours after the dose.[3]

After a single dose of 1 gram of cefazolin given intravenously to 15 women who were 1 month postpartum, milk cefazolin levels averaged 0.75 mg/L 2 hours after the dose.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cephalexin, Dicloxacillin, Floxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Fukada M. Studies on chemotherapy during the perinatal period with special reference to such derivatives of cephalosporin C as cefazolin, cephaloridine and cephalothin. Jpn J Antibiot 1973;26:197-214.4542543
2 von Kobyletzki D, Reither K, Gellen J, et al. Pharmakokinetische untersuchungen mit cefazolin in geburtshilfe und gynakologie. Infection 1974;2 (Suppl 1):60-7.
3 Yoshioka H, Cho K, Takimoto M, et al. Transfer of cefazolin into human milk. J Pediatr 1979;94:151-2.758399
4 Zhang Y, Zhang Q, Xu Z. Tissue and body fluid distribution of antibacterial agents in pregnant and lactating women. Zhonghua Fu Chan Ke Za Zhi 1997;32:288-92.9596854

## Substance Identification

### Substance Name

Cefazolin

### CAS Registry Number

25953-19-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins